# Phenprocoumon

CASRN: 435-97-2

## Drug Levels and Effects

### Summary of Use during Lactation

Phenprocoumon is not approved by the U.S. Food and Drug Administration (FDA). Limited information indicates that anticoagulant maternal doses of phenprocoumon produce low levels in milk. Until more data are available, shorter-acting anticoagulants are preferred, especially if the infant is younger than 2 months.

### Drug Levels

Maternal Levels. One mother required anticoagulation postpartum was given phenprocoumon as an anticoagulant. Milk samples were obtained on days 27, 28 and 31 postpartum when her prothrombin time and phenprocoumon serum concentrations were stable. Milk phenprocoumon concentrations varied between 26 and 76 mcg/L and concentrations were higher in hindmilk than foremilk. A complete 24-hour milk collection contained a concentration of 33 mcg/L of phenprocoumon.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 von Kries R, Nocker D, Schmitz-Kummer E, et al. Transfer of phenprocoumon in breast milk. Is oral anticoagulation with phenprocoumon a contraindication for breastfeeding? Monatsschr Kinderheilkd 1993;141:505-7.8336747

## Substance Identification

### Substance Name

Phenprocoumon

### CAS Registry Number

435-97-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants